# Hydroquinone

CASRN: 123-31-9

## Drug Levels and Effects

### Summary of Use during Lactation

Topical hydroquinone has not been studied during breastfeeding. Although hydroquinone is not contraindicated during breastfeeding, some experts feel that long-term use of hydroquinone should not be used in nursing mothers.[1,2] If hydroquinone is used, ensure that the infant's skin does not come into direct contact with the areas of maternal skin that have been treated and the infant does not ingest the product from the mother's skin.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Yaghi M, McMullan P, Truong TM, et al. Safety of dermatologic medications in pregnancy and lactation: An Update - Part II: Lactation. J Am Acad Dermatol 2024;91:651–68.38280680
2 Lyons CE, Smith AD., Schwartzman G., et al. Managing skin diseases that flare during pregnancy and in the postpartum period: Part 2- Management & safety considerations. J Am Acad Dermatol 2026 41692217

## Substance Identification

### Substance Name

Hydroquinone

### CAS Registry Number

123-31-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antioxidants

Depigmentors

Dermatologic Agents

Hydroquinones